# Atorvastatin

CASRN: 110862-48-1

## Drug Levels and Effects

### Summary of Use during Lactation

The consensus opinion is that women taking a statin should not breastfeed because of a concern with disruption of infant lipid metabolism. However, others have argued that children homozygous for familial hypercholesterolemia are treated with statins beginning at 1 year of age, that statins have low oral bioavailability, and risks to the breastfed infant are low, especially with rosuvastatin and pravastatin.[1] Some evidence indicates that amounts of atorvastatin and its metabolites are milk are very low and it can be taken by nursing mothers with no obvious developmental problems in their infants. Until more data become available, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Three women who were taking atorvastatin in doses of 20, 40 and 80 mg once daily donated milk samples at 0, 1, 2, 4, 6, 8, 10, 12, and 24 hours after their dose. Aliquots of complete milk collections from both breasts were analyzed for atorvastatin and its active metabolites. The absolute infant dosages of atorvastatin was calculated at 0.066, 0.19, and 0.27 mcg/kg daily for the 20 mg, 40 mg, and 80 mg doses, respectively. The weight-adjusted relative infant dose of atorvastatin, 2-hydroxy- and 4-hydroxyatorvastatin was 0.05%, 0.09%, and 0.052% for atorvastatin doses of 20 mg, 40 mg, and 80 mg, respectively.[2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

In a case series of patients with homozygous familial hypercholesterolemia, 6 patients breastfed 11 infants after restarting statin therapy postpartum. The specific statin used by these women was not reported, most of the women on statin therapy were using atorvastatin, either 40 or 80 mg, daily. Normal early child development was reported for all offspring. Children started school at the appropriate age and no learning difficulties were reported.[3]

Two women who were taking atorvastatin in doses of 20 and 40 mg daily partially breastfed their infants. Mothers reported no infant adverse effects and no concerns about their development.[2]

### Effects on Lactation and Breastmilk

Gynecomastia has been reported in men taking atorvastatin.[4-6] Serum prolactin was normal in one case where it was measured.[6] In another case, possible rosuvastatin-induced gynecomastia resolved after the patient’s medication was changed to atorvastatin.[7]

Three women who were taking atorvastatin in doses of 20, 40 and 80 mg once daily donated milk samples at 0, 1, 2, 4, 6, 8, 10, 12, and 24 hours after their dose. Aliquots of complete milk collections were analyzed for cholesterol. Milk cholesterol levels were within previously established norms in the range of 10 mg/dL.[2]

### Alternate Drugs to Consider

Cholestyramine, Colesevelam, Colestipol

### References

1 Holmsen ST, Bakkebo T, Seferowicz M, et al. Statins and breastfeeding in familial hypercholesterolaemia. Tidsskr Nor Laegeforen 2017;137:686-7.28551957
2 Campbell L, Huseman K, Krutsch K, et al. Minimal transfer of atorvastatin and its metabolites in human milk: A case series. Breastfeed Med 2024;19:889-4.39268678
3 Botha TC, Pilcher GJ, Wolmarans K, et al. Statins and other lipid-lowering therapy and pregnancy outcomes in homozygous familial hypercholesterolaemia: A retrospective review of 39 pregnancies. Atherosclerosis 2018;277:502-7.30270091
4 Hammons KB, Edwards RF, Rice WY. Golf-inhibiting gynecomastia associated with atorvastatin therapy. Pharmacotherapy 2006;26:1165-8.16863492
5 Bostanitis I, Tsalidou M. Atorvastatin-induced gynecomastia in a dyslipidemic patient: A case report. Hellenic J Cardiol 2019;60:194-5.30145234
6 Famularo G, Sarrecchia C. Atorvastatin-associated gynecomastia. Ann Pharmacother 2021;55:1300-1.33472378
7 Oteri A, Catania MA, Travaglini R, et al. Gynecomastia possibly induced by rosuvastatin. Pharmacotherapy 2008;28:549-51.18363539

## Substance Identification

### Substance Name

Atorvastatin

### CAS Registry Number

110862-48-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents

Hydroxymethylglutaryl-CoA Reductase Inhibitors